# Lanolin

CASRN: 8006-54-0

## Drug Levels and Effects

### Summary of Use during Lactation

Lanolin is a yellow fat obtained from sheep’s wool. It has traditionally been used topically to treat sore, cracked nipples during breastfeeding. Highly purified lanolin products (e.g., HPA lanolin, Lansinoh) have the pesticide and detergent residues removed and the natural free alcohols reduced to below 1.5% to improve safety and reduce the allergic potential.[1] However, even highly-purified lanolin should be avoided in patients with a known allergy to wool.

Lanolin appears to be effective for the prevention and treatment of nipple pain during breastfeeding,[2] but not as a preventative initiated before delivery.[3] Studies, most of which used Lansinoh, have not found lanolin to be consistently different in efficacy from application of breastmilk, hydrogel dressings, peppermint gel, aloe vera or warm compresses.[4-13] A meta-analysis concluded that application of nothing or breastmilk may be superior to lanolin, but good studies are lacking.[14] One small nonblinded study found olive oil to be superior to lanolin for prevention of sore nipples.[15] A study in women with nipple trauma and pain comparing application of lanolin after each feeding to application of breastmilk plus a nipple shell found that the breastmilk and shell were more effective than lanolin.[16] A randomized study comparing highly purified lanolin (Lansinoh) to expressed breastmilk in 180 mothers, found lanolin to be superior to breastmilk over a 7-day period in reducing pain and the nipple trauma score. A systematic review found two studies of moderate quality found aloe vera and purslane to be more effective than lanolin in treating sore nipples during breastfeeding.[17] A more recent meta-analysis of controlled trials found lanolin to be superior to routine care in the treatment of nipple pain and trauma.[18] A small, preliminary study fund HPA lanolin to be less effective than coconut oil in preventing nipple trauma and cracking.[19]

A study comparing the various highly purified lanolin products found that HPA lanolin (Lansinoh Laboratories Inc.), Purelan (Medela AG) and two lanolin EU monograph compliant ingredients (Pharmalan PH EU-SO-(RB) and Corona-8 SO-(RB) (Croda, Goole, UK). The EU monograph compliant ingredients had the lowest level of contaminants. HPA lanolin contained an extremely low level of free lanolin alcohols, indicating a high level of purification, which was fourfold lower than Purelan. The HPA lanolin did not contain any detectable pesticide residues. Purelan contained a number of pesticide residues (diazinon, piperonyl butoxide, triflumuron); however, the levels were low and within the permitted limits.[20]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In a randomized, double-bind trial, lanolin was compared to an all-purpose nipple ointment containing mupirocin 1%, betamethasone 0.05%, and miconazole 2% for painful nipples while nursing in the first 2 weeks postpartum. The two treatments were equally effective in reducing nipple pain, nipple healing time, breastfeeding duration, breastfeeding exclusivity rate, mastitis and nipple symptoms, side effects or maternal satisfaction with treatment.[21]

A randomized trial in nursing women with damaged, painful nipples compared lanolin application to usual care, which was a variable mix of education or assistance by health professional, application of warm or cool compresses, analgesics, air drying the nipples or the use of breast shields. A blinded observer assessed healing via telephone calls to the mothers several times after randomization. No differences were found in nipple pain between the groups 4 to 7 days after randomization. No difference was found in breastfeeding self-efficacy at 4 days post-randomization or in the breastfeeding rates of the two groups at 4 and 12 weeks postpartum. Patient satisfaction with care was higher in the women who received lanolin.[22]

### References

1 Mohammadzadeh A, Farhat A, Esmaeily H. The effect of breast milk and lanolin on sore nipples. Saudi Med J 2005;26:1231-4.16127520
2 Vieira F, Bachion MM, Mota DD, . A systematic review of the interventions for nipple trauma in breastfeeding mothers. J Nurs Scholarsh 2013;45:116-25.23452043
3 Oliveira FS, Vieira F, Guimarães JV, . Lanolin and prenatal health education for prevention of nipple pain and trauma: Randomized clinical trial. Enferm Clin (Engl Ed) 2021;31:82-90.33277168
4 Morland-Schultz K, Hill PD. Prevention of and therapies for nipple pain: A systematic review. J Obstet Gynecol Neonatal Nurs 2005;34:428-37.
5 Melli MS, Rashidi MR, Nokhoodchi A, . A randomized trial of peppermint gel, lanolin ointment, and placebo gel to prevent nipple crack in primiparous breastfeeding women. Med Sci Monit 2007;13:CR406-11.17767120
6 Abou-Dakn M, Fluhr JW, Mo G, . Positive effect of HPA lanolin versus expressed breastmilk on painful and damaged nipples during lactation. Skin Pharmacol Physiol 2011;24:27-35.20720454
7 Shanazi M, Farshbaf Khalili, A, Kamalifard M, . Comparison of the effects of lanolin, peppermint, and dexpanthenol creams on treatment of traumatic nipples in breastfeeding mothers. J Caring Sci 2015;4:297-307.26744729
8 Dodd V, Chalmers C. Comparing the use of hydrogel dressings to lanolin ointment with lactating mothers. J Obstet Gynecol Neonatal Nurs 2003;32:486-95.
9 Pugh LC, Buchko BL, Bishop BA, . A comparison of topical agents to relieve nipple pain and enhance breastfeeding. Birth 1996;23:88-93.8826172
10 Saeidi R, Tafazoli M, Gholami M, . New treatment for nipple soreness in breastfeeding mothers: A clinical trial study. Iran J Neonatol 2015;6:48-51. http://ijn.mums.ac.ir/issue_626_671_Volume+6%2C+Issue+2%2C+Spring+2015.html
11 Perić O, Pavičić Bošnjak A, Mabić M, . Comparison of lanolin and human milk treatment of painful and damaged nipples: A randomized control trial. J Hum Lact 2022;39:236-44.36401521
12 Elagamy MAEE, Shahin MA, Elkhalek NKA. Effect of breast milk versus lanolin on healing of sore nipple among postnatal lactating mothers. Egyptian Journal of Health Care 2019;10:371-87.
13 Barja-Ore J, Vargas-Fernández R, Comandé D, . Efficacy and safety of topical application of breast milk compared with lanolin for reducing nipple cracks and pain in breastfeeding mothers: A systematic review and meta-analysis of randomized clinical trials. Breastfeed Med 2026:15568253261470292.
14 Dennis CL, Jackson K, Watson J. Interventions for treating painful nipples among breastfeeding women. Cochrane Database Syst Rev 2014;12:CD007366.
15 Gungor AN, Oguz S, Vurur G, . Comparison of olive oil and lanolin in the prevention of sore nipples in nursing mothers. Breastfeed Med 2013;8:334-5.23249138
16 Vieira F, Mota DD, Castral TC, . Effects of anhydrous lanolin versus breast milk combined with a breast shell for the treatment of nipple trauma and pain during breastfeeding: A randomized clinical trial. J Midwifery Womens Health 2017;62:572-9.28887855
17 Pezeshki B, Pouredalati M, Zolala S, . Comparison of the effect of aloe vera extract, breast milk, calendit-E, curcumin, lanolin, olive oil, and purslane on healing of breast fissure in lactating mothers: A systematic review. International Journal of Pediatrics (Mashhad) 2020;8:10853-63. doi:10.22038/ijp.2020.46125.3760
18 Shetty AP, Halemani K, Issac A, . Effectiveness of the application of lanolin, aloe vera, and peppermint on nipple pain and nipple trauma in lactating mothers: A systematic review and meta-analysis. Matern Child Health J 2024;28:2013-25.39436586
19 Riley SG, Cesario S. Effectiveness of highly purified anhydrous lanolin versus extra-virgin coconut oil in preventing subacute lactation mastitis. J Hum Lact 2026:8903344261458636.
20 Bourdillon K, McCausland T, McCabe M. Multi-residue analysis of certain lanolin nipple care products for trace contaminants. BMC Chem 2023;17:8.36849952
21 Dennis CL, Schottle N, Hodnett E, . An all-purpose nipple ointment versus lanolin in treating painful damaged nipples in breastfeeding women: A randomized controlled trial. Breastfeed Med 2012;7:473-9.22428572
22 Jackson KT, Dennis CL. Lanolin for the treatment of nipple pain in breastfeeding women: A randomized controlled trial. Matern Child Nutr 2017;13:e12357.27477840

## Substance Identification

### Substance Name

Lanolin

### CAS Registry Number

8006-54-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cosmetics

Pharmaceutic Aids

Waxes